# Ticagrelor

CASRN: 274693-27-5

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the use of ticagrelor during breastfeeding. Because ticagrelor and its active metabolite are more than 99% bound to plasma proteins, the amount in milk is likely to be low. However, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. If it is used by a nursing mother, monitor the infant for bruising and bleeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aspirin

## Substance Identification

### Substance Name

Ticagrelor

### CAS Registry Number

274693-27-5

### Drug Class

- Breastfeeding
- Lactation
- Purinergic P2Y Receptor Antagonists
- Platelet Aggregation Inhibitors